# Sodium Picosulfate

CASRN: 10040-45-6

## Drug Levels and Effects

### Summary of Use during Lactation

Sodium picosulfate is not absorbed from the gastrointestinal tract, and its active metabolite, which is absorbed, is not detectable in breastmilk. Sodium picosulfate can be taken during breastfeeding and no special precautions are required.

### Drug Levels

Maternal Levels. Sixteen postpartum women who were not breastfeeding, but were producing at least 200 mL of milk daily by breast pump were given either oral enteric-coated bisacodyl tablets (Dulcolax) 10 mg daily or oral liquid sodium picosulfate (Laxoberal) 10 mg daily for 7 days. Both drugs are prodrugs metabolized to the active drug, bis-(p-hydroxyphenyl)-2-pyridyl-2-methane (BHPM). All breastmilk was collected daily from the day before drug administration to 2 days after the last dose. Free and conjugated BHPM were undetectable (<1 mcg/L) in all milk samples.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Bisacodyl, Docusate, Magnesium Hydroxide, Psyllium, Sodium Phosphate

### References

1 Friedrich C, Richter E, Trommeshauser D, et al. (2011). Lack of excretion of the active moiety of bisacodyl and sodium picosulfate into human breast milk: an open-label, parallel group, multiple dose study in healthy lactating women. Drug Metab Pharmacokinet.

## Substance Identification

### Substance Name

Sodium Picosulfate

### CAS Registry Number

10040-45-6

### Drug Class

Breast Feeding

Lactation

Cathartics

Gastrointestinal Agents